# Nevirapine

CASRN: 129618-40-2

## Drug Levels and Effects

### Summary of Use during Lactation

Nevirapine has been well studied in nursing mothers and is well tolerated by infants, even when given directly to infants for prophylaxis.[1] Because of the long half-life of nevirapine, subtherapeutic nevirapine concentrations can persist in breastmilk and infant serum for relatively long periods, potentially increasing the risk of development of breastmilk transmission of nevirapine-resistant HIV infections when it is used in the mother.[2-9] Achieving and maintaining viral suppression with antiretroviral therapy decreases breastfeeding transmission risk to less than 1%, but not zero. Individuals with HIV who are on antiretroviral therapy with a sustained undetectable viral load and who choose to breastfeed should be supported in this decision. If a viral load is not suppressed, banked pasteurized donor milk or formula is recommended.[10,11] Extended postnatal prophylaxis of breastfed infants with nevirapine should continue until breastfeeding is stopped.[12]

### Drug Levels

Maternal Levels. Four breastmilk samples were obtained from 3 mothers who were taking nevirapine either 100 mg or 200 mg daily. Milk concentrations averaged 76% (range 54 to 104%) of maternal serum concentrations.[13]

Twenty-one women received a single 200 mg oral dose of nevirapine during labor. Milk samples were collected 48, 72 and 168 hours after the dose. Breastmilk concentration of nevirapine were 454 mcg/L (range 219 to 972 mcg/L) at 48 hours postpartum and declined to 103 mcg/L (range 25 to 309 mcg/L) at 7 days postpartum. Milk levels declined in parallel with the maternal serum concentration with a half-life averaging 61 hours.[14]

Three women were receiving nevirapine 200 mg twice daily as part of a highly active antiretroviral combination regimen. During the first 5 days postpartum milk was collected just before and 2 hours after the dose of nevirapine. Breastmilk nevirapine concentrations from milk samples ranged between 68 and 90% of the maternal serum concentration. Further details on the timing, or actual breastmilk concentrations were not provided.[15]

Twenty women who were receiving oral nevirapine 200 mg twice daily as part of a combination antiretroviral regimen had their milk analyzed at either 2 or 5 months postpartum. Milk samples were provided at a median of 4 hours (range 1 to 8.5 hours) after the last dose. The median nevirapine concentration in breastmilk was 6.8 mg/L.[16]

Forty women were given postpartum prophylaxis with unstated dosages of lamivudine, nevirapine and zidovudine (or stavudine if the hemoglobin <8 g/dL). Blood and milk samples were collected once during the first 3 days postpartum and once at 7 days postpartum. The median times after a dose that samples were collected were 5.3 hours (range 0 to 99 hours) for the first sample and 6 hours (range 4.3 to 20 hours) for the 7-day sample. Average breastmilk nevirapine concentrations were calculated only for samples that had detectable (>50 mcg/L) concentrations of nevirapine. The mean breastmilk concentrations were 2.3 (n = 34) and 2.2 mg/L (n = 36), respectively, at the two sampling times, which was 60 to 80% of the simultaneous maternal serum concentrations.[17]

Free and total breastmilk nevirapine concentrations were measured in one woman for 22 days after her last dose of nevirapine 200 mg which was given as part of a combination antiretroviral regimen to prevent mother-to-child transmission of HIV. The peak whole milk concentration was 2.7 mg/L. Nevirapine was detectable in whole breastmilk for up to 17 days after the dose with an average (of left and right breasts) concentration of 13 mcg/L at that time. The average half-life was 70.6 hours. The peak unbound milk concentration was 1.5 mg/L. Nevirapine was detectable in whole breastmilk for up to 13 days after the dose with an average (of left and right breasts) concentration of 15.5 mcg/L at that time. The average half-life was 58 hours.[18]

Twenty-one samples of breastmilk and maternal serum were obtained at 6, 12 and 24 weeks postpartum from mothers taking nevirapine as part of a combination of antiretrovirals. The nevirapine dosage the mothers were taking was not stated in the abstract. The median breastmilk concentrations of nevirapine were 1.3 mg/L at a median of 15 hours after the last dose at 6 weeks postpartum (8 samples), 3.4 mg/L at a median of 13 hours after the last dose at 12 weeks postpartum (7 samples), and 1.2 mg/L at a median of 12 hours after the last dose at 24 weeks postpartum (6 samples). Median milk concentrations were 12% (interquartile range 0 to 30%) of maternal plasma concentrations.[19] In a related study by the same authors, the nevirapine milk to plasma ratio was found to be 0.82 in 39 patients.[20]

Fifty-eight mothers who were taking a combination regimen of lamivudine, nevirapine and zidovudine had their serum and breastmilk analyzed for the presence of these drugs. Mothers took nevirapine 200 mg daily for 14 days, then 200 mg twice daily starting at 34 to 36 weeks postpartum and continuing until 6 months postpartum. Breastmilk was collected within 24 hours after delivery and at 2, 6, 14 and 24 weeks postpartum at variable times after the previous dose. The median breastmilk lamivudine concentration across all visits was 4546 mcg/L. The authors estimated that a fully breastfed infant would receive a daily dosage of 682 mcg/kg of nevirapine.[21]

Sixty-two women received a single 200 mg dose of nevirapine at a median time of 5.2 hours before delivery. Breastmilk was obtained from each breast at delivery and 1, 2, and 6 weeks after the dose. A total of 116 breastmilk samples were obtained and analyzed. At delivery, the median breastmilk nevirapine concentration was 1012 mcg/L (interquartile range [IQR] 657 to 1364 mcg/L). At 1 week postpartum, breastmilk nevirapine had a median concentration of 164 mcg/L (IQR 75 to 213 mcg/L); breastmilk obtained 13 to 16 days postpartum had a median nevirapine concentration of 17 mcg/L (IQR 15 to 35 mcg/L). Nevirapine was undetectable (<15 mcg/L) in breastmilk at 6 weeks postpartum. Maternal plasma and breastmilk nevirapine concentrations fell with a half-life of 50.3 hours. A pharmacokinetic simulation indicated that breastmilk nevirapine concentrations fell below the IC50 for HIV at a median of 17 days (range 11.25 to 25.8 days) postpartum.[3]

Milk samples were analyzed for nevirapine after mothers took a single 200 mg dose of nevirapine at the onset of labor. Of 51 mothers’ milk samples, 47 had detectable nevirapine one week after taking the dose, with a median concentration of 112 mcg/L. At 2 weeks after the dose, the median concentration was 15 mcg/L in 40 milk samples assayed. At 4 weeks, nevirapine was undetectable (<10 mcg/L) in all 43 samples assayed.[22]

Fifty-seven mothers who were receiving nevirapine 200 mg twice daily as part of a combination antiretroviral regimen provided a total of 181 milk samples at birth, 1 month, 3 months and/or 6 months postpartum. Milk samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous dose. The median breastmilk nevirapine concentration was 2901 mcg/L (range 2097 to 4684 mcg/L).[23]

Fifteen women had been taking nevirapine 200 mg twice daily as part of one of three drug combinations. Breastmilk samples were collected at just before a dose at a median of 1 month postpartum. Whole breastmilk levels contained a median of 1.83 mg/L of nevirapine, which was a median of 27% of maternal blood levels.[24]

From a study of 224 women who received a single dose of nevirapine 200 mg at delivery, 1212 breastmilk samples were obtained at either 1 week and/or 4 weeks postpartum. At 1 week postpartum, nevirapine was detectable in 98% of women with median concentration of 0.22 mg/L. At 4 weeks, nevirapine was not detectable in breastmilk.[25]

Five HIV-positive nursing mothers taking nevirapine 200 mg every 12 hours provided breastmilk samples 0.5, 1, 2, 4, 8 and 12 hours after a dose. Mean peak and trough nevirapine concentrations in breastmilk were 5.2 mg/L and 4.3 mg/L, respectively. The trough values occurred at 0.5 hours after the dose and peak values occurred at 4 hours after the dose.[26]

Twenty-eight women who were receiving nevirapine 200 mg twice daily and had genetic variations in CYP2B6 had various pharmacokinetic parameters calculated related to drug excretion into breastmilk. Three polymorphisms in this enzyme resulted in differing amounts of nevirapine excreted into breastmilk, apparently related to differences in maternal plasma concentrations. These differences were reflected varying infant plasma nevirapine concentrations.[27]

Mothers receiving 200 mg of nevirapine per day as part of their anti-HIV regimen provided milk samples at a median of 17.5 months (range 14 to 22 months) postpartum. The median breastmilk nevirapine concentration was 425.2 (IQR 410 to 591) mcg/L. Times of milk collection were not clearly stated, but maternal plasma concentrations were obtained at a median of 3.5 (IQR 2.5 to 4.5) hours after a dose.[8]

Two mothers taking nevirapine 400 mg once daily provided 5 milk samples at a median of 14.5 hours after a dose. The median drug concentration in milk was 2721 mcg/L, which resulted in an estimated infant dosage of 0.41 mg/kg daily and a relative infant dose of 3.4% of the maternal weight-adjusted dosage.[28]

Infant Levels. Twenty nursing mothers were receiving oral nevirapine 200 mg twice daily as part of a combination antiretroviral regimen. Their infants had serum concentrations determined at either 2 or 5 months postpartum. Serum samples were provided at a median of 4 hours (range 1 to 8.5 hours) after the last dose. The median infant serum nevirapine concentration was 971 mcg/L (range <16 to 2191 mcg/L). The average value was 40 times the IC50 for HIV.[16]

The infants of postpartum mothers taking nevirapine as part of a combination of antiretrovirals had undetectable serum nevirapine concentrations by HPLC/MS analysis. The nevirapine dosage the mothers were taking, and the times of infant plasma sampling were not stated in the abstract. Infant serum concentrations were measured at 6 (8 samples), 12 (7 samples), and 24 (6 samples) weeks of age at averages of 15, 13 and 12 hours after the last maternal dose. Median infant serum nevirapine concentrations were 584, 607 and 233 mcg/L, respectively, which was 12% of the maternal serum concentration.[19]

Fifty-eight infants whose mothers were taking a combination regimen of lamivudine, nevirapine and zidovudine had their serum analyzed for the presence of these drugs. Mothers took nevirapine 150 mg twice daily starting at 34 to 36 weeks postpartum and continuing until 6 months postpartum and were instructed to exclusively breastfeed for 5.5 months. Serum samples were collected within 24 hours after delivery and at 2, 6, 14 and 24 weeks postpartum. The median infant dried blood spot nevirapine concentrations were 2963 mcg/L at delivery, 987 mcg/L at week 2, 1032 mcg/L at week 6, 734 mcg/L at week 14 and 303 mcg/L at week 24 postpartum.[21]

Breastfed infants of 58 mothers who were receiving nevirapine 200 mg twice daily as part of a combination antiretroviral regimen had a total of 58 blood samples analyzed at 1 month, 3 months and/or 6 months postpartum. Samples were collected at a median of 4.5 hours (range 3.5 to 6 hours) after the previous maternal dose and a median of 30 minutes (range 20 to 60 minutes) after the previous nursing. The infants’ median nevirapine plasma concentration was 809 mcg/L (range 535 to 1061 mcg/L, which was a median of 18% (range 14 to 24%) of the maternal serum concentration.[23]

Nine infants were breastfed either partially or exclusively by their mothers who had been taking nevirapine 200 mg twice daily as part of a drug combination that included zidovudine and lamivudine. Infant blood was collected at a median of 1 month postpartum at 12 to 17 hours after the last dose and a median of 1 hour (range 6 minutes to 35 hours) after the last breastfeeding. All nine infants had detectable nevirapine levels in their serum, with a median concentration of 370 mcg/L (range 240 to 1200 mcg/L).[24]

Four HIV-positive nursing mothers were taking nevirapine 200 mg every 12 hours. Their breastfed infants had serum nevirapine concentrations of 529 mcg/L and 556 mcg/L, at 2 and 8 h after the maternal dose, respectively.[26]

Two infants were breastfed by mothers taking nevirapine 400 mg once daily although the extent of breastfeeding was not sated. Infant serum concentrations taken at 1 month of age were 960 mcg/L at 12 hours after the maternal dose in one infant and 227 mcg/L at 21 hours after the dose in the other.[28]

In a retrospective study in a German hospital, one mother who was receiving nevirapine 200 mg twice daily exclusively breastfed her infant. Infant serum concentrations obtained at unspecified times were 1208 mcg/L at 1 month of age, 1146 mcg/L at 4 months of age and 649 mcg/L at 6 months of age.[29]

### Effects in Breastfed Infants

A study assigned pregnant women to zidovudine alone or highly-active antiretroviral therapy (HAART: zidovudine, lamivudine and nevirapine) to prevent maternal-to-child transmission of HIV infection. After delivery, all infants received one month of zidovudine prophylaxis; some infants were breastfed and others were formula fed. A higher percentage of infants in the HAART-exposed group had neutropenia than those in the unexposed group at 1 month of age (15.9 and 3.7%, respectively). Hematologic toxicity was transient and asymptomatic. From 2 to 6 months postpartum, no differences in hematologic toxicity were seen between breastfed and formula-fed infants. No statistical difference in hepatic toxicity was seen between the breastfed and formula-fed infants.[30]

A study compared the frequency of rash, hepatotoxicity, and hyperbilirubinemia among 464 breastfed infants whose mothers were taking either nevirapine (n = 258) or nelfinavir (n = 206) along with zidovudine and lamivudine for HIV infection during pregnancy and postpartum. Infants were examined during the first, second and sixth weeks postpartum. Moderate rash occurred in 7 (2.7%) of the infant exposed to nevirapine and one (0.5%) infant exposed to nelfinavir. Rash occurred at a median of 2 weeks postpartum. Four infants (1.9%) exposed to nelfinavir developed hepatotoxicity (3 moderate and 1 severe) and none exposed to nevirapine. Twenty-one infants (4.5%) developed high-risk hyperbilirubinemia, all prior to 48 hours of age, but there was no difference in exposure between the two drugs.[31]

### Effects on Lactation and Breastmilk

Hyperprolactinemia and galactorrhea occurred in a woman on a combination antiretroviral regimen after nevirapine was substituted for nelfinavir. Galactorrhea ceased rapidly after nevirapine was discontinued.[32] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Capparelli E, Ruel T, Bekker A, . Once-daily nevirapine prophylaxis during breastfeeding in preterm infants using weight band dosing. Br J Clin Pharmacol 2026;92 S13-S4. doi:10.1002/bcp.70749
2 Arrivé E, Newell ML, Ekouevi DK, . Prevalence of resistance to nevirapine in mothers and children after single-dose exposure to prevent vertical transmission of HIV-1: A meta-analysis. Int J Epidemiol 2007;36:1009-21.17533166
3 Kunz A, Frank M, Mugenyi K, . Persistence of nevirapine in breast milk and plasma of mothers and their children after single-dose administration. J Antimicrob Chemother 2009;63:170-7.18974161
4 Moorthy A, Gupta A, Bhosale R, . Nevirapine resistance and breast-milk HIV transmission: effects of single and extended-dose nevirapine prophylaxis in subtype C HIV-infected infants. PLoS ONE 2009;4:e4096.19119321
5 Hudelson SE, McConnell MS, Bagenda D, . Emergence and persistence of nevirapine resistance in breast milk after single-dose nevirapine administration. AIDS 2010;24:557-61.20057308
6 Gantt S, Payant R, Carlsson J, . Nevirapine-resistant HIV-1 DNA in breast milk after single-dose nevirapine with or without zidovudine for prevention of mother-to-child transmission. J Pediatric Infect Dis Soc 2012;1:244-9.23687579
7 Micek MA, Dross S, Blanco AJ, . Transmission of nevirapine-resistant HIV type 1 via breast milk to infants after single-dose nevirapine in Beira, Mozambique. J Infect Dis 2014;210:641-5.24596282
8 Pressiat C, Toni TD, Treluyer JM, . High nevirapine levels in breast milk and consequences in HIV-infected child when initiated on antiretroviral therapy. Aids 2021;35:2409-10.34723858
9 Boyce CL, Sils T, Ko D, . Maternal human immunodeficiency virus (HIV) drug resistance is associated with vertical transmission and is prevalent in infected Infants. Clin Infect Dis 2022;74:2001-9.34467974
10 World Health Organization. Consolidated guidelines on HIV prevention, testing, treatment, service delivery and monitoring: Recommendations for a public health approach. 2021 https://www.who.int/publications/i/item/9789240031593
11 Department of Health and Human Services. Recommendations for the use of antiretroviral drugs during pregnancy and interventions to reduce perinatal HIV transmission in the United States. 2024 https://clinicalinfo.hiv.gov/sites/default/files/guidelines/documents/perinatal-hiv/guidelines-perinatal.pdf
12 Van de Perre P, Moles JP, Nagot N. HIV postnatal prophylaxis: How long is long enough? Expert Rev Anti Infect Ther 2025;23:1075-81.41216942
13 Mirochnick M, Fenton T, Gagnier P, . Pharmacokinetics of nevirapine in human immunodeficiency virus type 1-infected pregnant women and their neonates. Pediatric AIDS clinical trials group protocol 250 team. J Infect Dis 1998;178:368-74.9697716
14 Musoke P, Guay LA, Bagenda D, . A phase I/II study of the safety and pharmacokinetics of nevirapine in HIV-1-infected pregnant Ugandan women and their neonates (HIVNET 006). AIDS 1999;13:479-86.10197376
15 Colebunders R, Hodossy B, Burger D, . The effect of highly active antiretroviral treatment on viral load and antiretroviral drug levels in breast milk. AIDS 2005;19:1912-5.16227801
16 Shapiro RL, Holland DT, Capparelli E, . Antiretroviral concentrations in breast-feeding infants of women in Botswana receiving antiretroviral treatment. J Infect Dis 2005;192:720-7.16088821
17 Giuliano M, Guidotti G, Andreotti M, . Triple antiretroviral prophylaxis administered during pregnancy and after delivery significantly reduces breast milk viral load study within the Drug Resource Enhancement Against AIDS and Malnutrition Program. J Acquir Immune Defic Syndr 2007;44:286-91.17146372
18 Bennetto-Hood C, Aldrovandi GM, King JR, . Persistence of nevirapine in breast milk after discontinuation of treatment. Clin Infect Dis 2007;45:391-4.17599320
19 Corbett A, Kashuba A, Rezk N, . Antiretroviral drug concentrations in breast milk and breastfeeding infants. 15th Annual Conference on Retroviruses and Opportunistic Infections (CROI) 2/3/2008 to 2/6/2008; Boston, MA Poster # 648 2008
20 Rezk NL, White N, Bridges AS, . Studies on antiretroviral drug concentrations in breast milk: Validation of a liquid chromatography-tandem mass spectrometric method for the determination of 7 anti-human immunodeficiency virus medications. Ther Drug Monit 2008;30:611-9.18758393
21 Mirochnick M, Thomas T, Capparelli E, . Antiretroviral concentrations in breast-feeding infants of mothers receiving highly active antiretroviral therapy. Antimicrob Agents Chemother 2009;53:1170-6.19114673
22 Aizire J, McConnell MS, Mudiope P, . Kinetics of nevirapine and its impact on HIV-1 RNA levels in maternal plasma and breast milk over time after perinatal single-dose nevirapine. J Acquir Immune Defic Syndr 2012;60:483-8.22217678
23 Palombi L, Pirillo MF, Andreotti M, . Antiretroviral prophylaxis for breastfeeding transmission in Malawi: drug concentrations, virological efficacy and safety. Antivir Ther 2012;17:1511-9.22910456
24 Shapiro RL, Rossi S, Ogwu A, . Therapeutic levels of lopinavir in late pregnancy and abacavir passage into breast milk, in the Mma Bana Study, Botswana. Antivir Ther 2013;18:585-90.23183881
25 Salado-Rasmussen K, Theilgaard ZP, Chiduo MG, . Nevirapine, sodium concentration and HIV-1 RNA in breast milk and plasma among HIV-infected women receiving short-course antiretroviral prophylaxis. PLoS One 2015;10:e0121111.25812161
26 Olagunju A, Amara A, Waitt C, . Validation and clinical application of a method to quantify nevirapine in dried blood spots and dried breast-milk spots. J Antimicrob Chemother 2015;70:2816-22.26108608
27 Olagunju A, Khoo S, Owen A. Pharmacogenetics of nevirapine excretion into breast milk and infants’ exposure through breast milk versus postexposure prophylaxis. Pharmacogenomics 2016;17:891-906.27268507
28 Aebi-Popp K, Kahlert CR, Crisinel PA, . Transfer of antiretroviral drugs into breastmilk: A prospective study from the Swiss Mother and Child HIV Cohort Study. J Antimicrob Chemother 2022;77:3436-42.36177836
29 Spielberger BD, Zink A, Rohr JC, . Breastfeeding on ART and a closer look at drug transfer to HIV-exposed uninfected infants. Sci Rep 2025;15:32612.40968165
30 Bae WH, Wester C, Smeaton LM, . Hematologic and hepatic toxicities associated with antenatal and postnatal exposure to maternal highly active antiretroviral therapy among infants. AIDS 2008;22:1633-40.18670224
31 Minniear TD, Zeh C, Polle N, . Rash, hepatotoxicity and hyperbilirubinemia among Kenyan infants born to HIV-infected women receiving triple-antiretroviral drugs for the prevention of mother-to-child HIV transmission. Pediatr Infect Dis J 2012;31:1155-7.22772167
32 Duval X, Larger E, Longuet P, . Galactorrhoea, hyperprolactinaemia, and protease inhibitors. Lancet 2001;357:475.

## Substance Identification

### Substance Name

Nevirapine

### CAS Registry Number

129618-40-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiviral Agents

Anti-HIV Agents

Anti-Retroviral Agents

Reverse Transcriptase Inhibitors